# Cimetidine

CASRN: 51481-61-9

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal cimetidine doses of 1000 to 1200 mg daily result in infant dosages that are much less than reported neonatal dosages of 5 to 10 mg/kg daily. Cimetidine would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. However, because of its potential for causing hepatic enzyme inhibition, other drugs might be preferred. Cimetidine can increase serum prolactin and it has been used, but not validated, as a galactogogue.

### Drug Levels

Maternal Levels. After a single oral dose of 400 mg of cimetidine, the peak milk level of 5 mg/L occurred about 3 hours after the dose and was about equal to the peak serum level in a woman who had been breastfeeding for 6 months. Milk levels remained higher than serum levels for the duration of the dosing interval. With a multiple-dose regimen of 200 mg 3 times daily and 400 mg at bedtime, milk levels just prior to the doses were relatively constant between 4.9 and 6 mg/L.[1] These levels indicate that a fully breastfed infant would receive between 0.74 and 0.9 mg/kg daily.

Twelve healthy, lactating human volunteers who were 6 to 45 weeks postpartum were given single doses of cimetidine 100 mg, 600 mg and 1200 mg on 3 different days within a 15-day period. Blood and milk samples were donated before each dose and 11 times over the next 24 hours. Average peak cimetidine levels in milk occurred at 3.3 hours after the dose. The dose-normalized peak milk level was 2.5 to 3.1 mg/L for each 100 mg of dosage. The half-life in milk was 2.5 hours, which was longer than in serum (1.4 hours).[2] Using data from the paper, a fully breastfed infant whose mother was receiving 1200 mg daily would receive an average dose of 1.4 mg/kg daily, which is in the neonatal dosage range. Average milk values equated to a steady-state weight-adjusted relative infant dose of 1.1% of the maternal weight-adjusted dose

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Histamine H2-receptor blockade is known to stimulate prolactin secretion. In addition, cimetidine may have additional, nonspecific actions that stimulate prolactin secretion.[3] Oral cimetidine doses of 400 mg 4 times daily increased serum prolactin by 50 to 112% in 6 patients. Cimetidine has caused dose-related gynecomastia and galactorrhea in men and nonnursing women.[4-6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One clinician reported that she used cimetidine 200 or 300 mg 4 times daily to nursing mothers with a marginal or low milk supply. Subjective reports indicated an increase in milk supply.[7]

### Alternate Drugs to Consider

Antacids, Famotidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Somogyi A, Gugler R. Cimetidine excretion into breast milk. Br J Clin Pharmacol 1979;7:627-9.465286
2 Oo CY, Kuhn RJ, Desai N, et al. Active transport of cimetidine into human milk. Clin Pharmacol Ther 1995;58:548-55.7586949
3 Knigge UP. Histaminergic regulation of prolactin secretion. Dan Med Bull 1990;37:109-24.2188799
4 Delle Fave FG, Tamburrano G, De Magistris L, et al. Gynaecomastia with cimetidine. Lancet 1977;309:1319.68422
5 Bateson MC, Browning MCK, Maconnachie A. Galactorrhoea with cimetidine. Lancet 1977;310:247-8.69853
6 García Rodríguez, LA, Jick H. Risk of gynaecomastia associated with cimetidine, omeprazole, and other antiulcer drugs. BMJ 1994;308:503-6.8136667
7 Mouzoon ME. Broader options for galactagogue therapy - Consideration of H2 receptor blockers. Breastfeed Med 2023;18:A10-A1. doi:10.1089/bfm.2023.29253.abstracts

## Substance Identification

### Substance Name

Cimetidine

### CAS Registry Number

51481-61-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Histamine H2 Antagonists

Gastrointestinal Agents